# Cinnamon

## Drug Levels and Effects

### Summary of Use during Lactation

Cinnamon (Cinnamomum verum, Cinnamomum zeylanicum, Ceylon cinnamon) contains cinnamaldehyde, polyphenols eugenol and cinnamic acid. Ceylon cinnamon should not be confused with cassia or Chinese cinnamon, which contains high amounts of the toxic ingredient coumarin. Other forms of cinnamon also exist. Ceylon cinnamon is "generally recognized as safe" (GRAS) for use as a flavoring by the U.S. Food and Drug Administration. No data exist on the safety of cinnamon in nursing mothers or infants. In general, cinnamon is well tolerated, with occasional bloating, dyspepsia, heartburn and nausea reported. Cinnamon has been used in Ayurvedic, Chinese traditional and folk medicine as a galactogogue.[1-4] No scientific studies could be located that evaluate the effect of cinnamon on the milk supply. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[5,6] Studies on the exposure of nursing infants to cinnamon odor found no effect on growth parameters, whereas maternal odor and maternal milk odor may have an effect on infant weight gain.[7]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Low Dog T. The use of botanicals during pregnancy and lactation. Altern Ther Health Med 2009;15:54–8.19161049
2 Mann BR, Zhang H. Improvement in lactation with traditional Chinese medicine and western herbal medicine: A case study. J Chin Med 2014;105:50–5.
3 Illamola SM, Amaeze OU, Krepkova LV, et al. Use of herbal medicine by pregnant women: What physicians need to know. Front Pharmacol 2019;10 30733675
4 Eid AM, Jaradat N. Public knowledge, attitude, and practice on herbal remedies used during pregnancy and lactation in West Bank Palestine. Front Pharmacol 2020;11:46.32116721
5 Brodribb W. ABM Clinical Protocol #9: Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med 2018;13:307–14.29902083
6 Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol 2021;137:e42–e53.33481531
7 Bali Bilgi O, Acikgoz A, Cakirli M. The effect of olfactory stimulation on growth parameters in newborn infants: A systematic review. Breastfeed Med 2025;20:94–101.39659255

## Substance Identification

### Substance Name

Cinnamon

### Scientific Name

Cinnamomum zeylanicum; Cinnamomum verum

### Drug Class

Breast Feeding

Lactation

Milk, Human

Complementary Therapies

Galactogogues

Phytotherapy

Plants, Medicinal